# Avalglucosidase Alfa

CASRN: 1802558-87-7

## Drug Levels and Effects

### Summary of Use during Lactation

Information available on the clinical use of avalglucosidase during breastfeeding indicates that it does not increase the alphaglucosidase activity of infants breastfed by mothers taking the drug. Two infants breastfed during maternal avalglucosidase therapy had no apparent adverse effects and were developing normally. No special precaution appear to be necessary.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Acid alphaglucosidase activity was measured in 6 dried blood spots from an infant whose mother was receiving avalglucosidase alfa 20 mg/kg every 2 weeks. Samples taken at various times after the maternal infusion had values ranging from about 1 to 9 micromol/L/hour of acid alphaglucosidase activity. In comparison, the mother’s blood acid alphaglucosidase activities before a dose were 0.5 micromol/L/hour and 169 micromol/L/hour 4 hours after a dose.[1]

### Effects in Breastfed Infants

A woman with late-onset Pompe disease was treated with alglucosidase starting after delivery. The infant was breastfed, with the instruction not to breastfeed for 24 hours after each infusion. At 2 months postpartum, therapy was changed to avalglucosidase. At 8 months postpartum, the infant was developing normally.[2]

A woman with late-onset Pompe disease was treated with avalglucosidase 20 mg/kg every 2 weeks during pregnancy and postpartum. Her infant was exclusively breastfed for 6 months and partially thereafter. The child was developing normally at follow-up at the age of 9 months.[1]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Alglucerase, Imiglucerase, Taliglucerase Alfa

### References

1 Bachmann M, Kasper D, Scholl-Bürgi S, et al. Enzyme replacement therapy during pregnancy and breastfeeding in late-onset Pompe disease. Int Breastfeed J 2025;20:92 41462273
2 Yanagihara C, Hayasaka Y, Kageyama Y. Pregnancy during enzyme replacement therapy with alglucosidase alfa over a 14-year period in late-onset Pompe disease. Neurol Clin Neurosci 2023;11:97-9. doi:10.1111/ncn3.12695

## Substance Identification

### Substance Name

Avalglucosidase Alfa

### CAS Registry Number

1802558-87-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy